# Procaine Penicillin G

CASRN: 54-35-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates penicillin G produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Procaine penicillin G is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. No studies have reported milk penicillin G levels after administration of procaine penicillin G to the mother.[1] However, after 2 doses of 2 million units of aqueous penicillin G intramuscularly in 15 women, peak milk levels were 120 units/L and trough levels were 10 units/L. Two women received 2.4 million units of benzathine penicillin G intramuscularly 20 hours after delivery. Milk concentrations decreased from 30 units/L on the third day to 10 units/L on the fifth day. After the fifth day, milk levels were undetectable.[2] Milk levels after 2 to 2.4 million units of procaine penicillin G would be expected to be between those of similar doses of aqueous and benzathine penicillin G.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A breastfed 1-month-old infant with congenital syphilis developed a Herxheimer reaction 6 hours after its mother received 2.4 million units of benzathine penicillin G intramuscularly. However, the baby had also received 10 units of penicillin G at about the same time as the mother's injection. The reaction was possibly caused by penicillin in breastmilk.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Rozansky R, Brzezinsky A. The excretion of penicillin in human milk. J Lab Clin Med 1949;34:497-500 18116312
2 Borderon E, Soutoul JH, Borderon JC, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6
3 Rollier R, Rollier M, Bellouchi M. Herxheimer's reaction in maternal milk in early congenital syphilis. Bull Soc Fr Dermatol Syphiligr 1967;74:178-80 6070262

## Substance Identification

### Substance Name

Procaine Penicillin G

### CAS Registry Number

54-35-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins